# Cholera Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Breastfeeding results in a markedly decreased risk of severe cholera in breastfed infants and maternal cholera vaccination increases it further. The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to cholera vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules.[1,2]

### Drug Levels

Maternal Levels. Administration of injectable cholera vaccine increases milk secretory IgA antibodies against cholera in the breastmilk in some reports.[3,4] Oral cholera vaccines result in a much lower increase in breastmilk anticholera antibodies.[5,6]

Ten nursing women in Sweden and ten in Pakistan were given subcutaneous injections of bivalent whole-cell cholera vaccine (Swedish National Bacteriological Laboratory) between 1 and 10 months postpartum, followed by a booster dose 14 days later. Before immunization only two of the Swedish women had detectable levels of antibodies against V. cholerae lipopolysaccharide in milk, and then in low titer. In the Pakistani women, titers of IgA antibodies against this antigen were found in 6 out of 10 of the prevaccination milk samples, suggesting earlier natural exposure. Vaccination did not result in greater than twofold rises of specific lgA,-lgG, or IgM antibodies in the milk of any of the Swedish women, nor did the booster immunization induce any milk antibody response. In the Pakistani women, the first dose of vaccine gave rise to significantly increased lgA antibody titers in 7 out of 10 of the milk samples. No significant increase was seen in IgG or IgM antibodies. This suggests that vaccination against cholera in persons living in nonendemic areas should include one or more oral doses of antigen for priming.[7]

Six mothers were given 3 doses of injectable inactivated whole cholera vaccine (Swedish National Bacteriological Laboratory) at 3-week intervals. Milk IgA antibody titers peaked in the first milk sample taken 2 weeks after the first vaccination. Only one of the 6 mothers had an enhanced response after the second vaccination. IgA antibodies were polymeric and short-lived (4 to 6 weeks).[8]

Twenty-one lactating Pakistani women were vaccinated with 3 doses of injectable inactivated whole cholera vaccine (Swedish National Bacteriological Laboratory) at 3-week intervals alone or in combination with oral Salmonella typhi vaccine. Milk IgA antibodies to V. cholerae LPS increased for 2 to 4 weeks in those given one or both vaccines. Combination of the 2 vaccines did not have any untoward effect on the antibody response in serum or in secretions against V. cholerae or S. typhi.[9]

Infant Levels. An open-label study in Bangladesh compared the serum immune response to administration of an oral cholera vaccine (Dukoral; containing killed cholera organisms and cholera subunit B) found that withholding breastfeeding for 3 hours before giving the vaccine resulted in a greater antibody response in infants between 10 and 18 months of age. In infants between 6 and 9 months of age, no difference in antibody response was seen between infants who had breastfeeding withheld and those who did not.[10]

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,11] Breastfeeding alone results in a 70% lower risk of severe cholera among breastfed infants up to 30 months with continued breastfeeding.[12]

Administration of oral cholera vaccine to the mother decreased the risk of cholera in their breastfed infants by 47% in one study. The authors hypothesized that vaccination of the mothers reduced their transmission of cholera to their infants.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Merson MH, Black RE, Sack DA, et al. Maternal cholera immunisation and scecretory IgA in breast milk. Lancet 1980;1:931–2.6103281
4 Svennerholm AM, Holmgren J, Hanson LA, et al. Boosting of secretory IgA antibody responses in man by parenteral cholera vaccination. Scand J Immunol 1977;6:1345–9.605366
5 Clemens JD, Sack DA, Chakraborty J, et al. Field trial of oral cholera vaccines in Bangladesh: Evaluation of anti-bacterial and anti-toxic breast-milk immunity in response to ingestion of the vaccines. Vaccine 1990;8:469–72.2251873
6 Jertborn M, Svennerholm AM, Holmgren J. Saliva, breast milk, and serum antibody responses as indirect measures of intestinal immunity after oral cholera vaccination or natural disease. J Clin Microbiol 1986;24:203–9.3528211
7 Svennerholm AM, Hanson LA, Holmgren J, et al. Different secretory immunoglobulin A antibody responses to cholera vaccination in Swedish and Pakistani women. Infect Immun 1980;30:427–30.7439987
8 Mascart-Lemone F, Carlsson B, Jalil F, et al. Polymeric and monomeric IgA response in serum and milk after parenteral cholera and oral typhoid vaccination. Scand J Immunol 1988;28:443–8.3194704
9 Hahn-Zoric M, Carlsson B, Jalil F, et al. The influence on the secretory IgA antibody levels in lactating women of oral typhoid and parenteral cholera vaccines given alone or in combination. Scand J Infect Dis 1989;21:421–6.2587944
10 Ahmed T, Svennerholm AM, Al Tarique A, et al. Enhanced immunogenicity of an oral inactivated cholera vaccine in infants in Bangladesh obtained by zinc supplementation and by temporary withholding breast-feeding. Vaccine 2009;27:1433–9.19146904
11 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
12 Clemens JD, Sack DA, Harris JR, et al. Breast feeding and the risk of severe cholera in rural Bangladeshi children. Am J Epidemiol 1990;131:400–11.2301350

## Substance Identification

### Substance Name

Cholera Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines